# Ketoprofen

CASRN: 22071-15-4

## Drug Levels and Effects

### Summary of Use during Lactation

Although ketoprofen has low levels in breastmilk, one center reported that they had received reports of adverse renal and gastrointestinal side effects in breastfed infants whose mothers were taking ketoprofen. Other agents are preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Eighteen women were given ketoprofen 100 mg every 12 hours (average 2.69 mg/kg daily) intravenously for 2 to 3 days postpartum. One to 4 milk samples were collected between the 3rd and 4th dose of ketoprofen. Of the 61 samples collected, ketoprofen was undetectable (<20 mcg/L) in 17 of the samples. The authors assumed a milk concentration of 20 mcg/L for undetectable samples and calculated an average milk concentration of 57 mcg/L (range 20 to 177 mcg/L). A fully breastfed infant would receive an average dosage of 8.5 mcg/kg daily or 0.31% of the maternal weight-adjusted dosage.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

All adverse reactions in breastfed infants reported in France between January 1985 and June 2011 were compiled by a French pharmacovigilance center. Of 174 reports, ketoprofen was reported to cause adverse reactions in 8 infants and to be one of the drugs most often suspected in serious adverse reactions, such as esophageal ulceration, erosive gastritis, meningeal hemorrhage, and renal insufficiency.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Jacqz-Aigrain E, Serreau R, Boissinot C, . Excretion of ketoprofen and nalbuphine in human milk during treatment of maternal pain after delivery. Ther Drug Monit 2007;29:815–8.18043481
2 Soussan C, Gouraud A, Portolan G, . Drug-induced adverse reactions via breastfeeding: A descriptive study in the French Pharmacovigilance Database. Eur J Clin Pharmacol 2014;70:1361–6.25183382

## Substance Identification

### Substance Name

Ketoprofen

### CAS Registry Number

22071-15-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal